# Ceftriaxone

CASRN: 73384-59-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ceftriaxone produce low levels in milk, which are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftriaxone is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Following administration of a 1 gram dose of ceftriaxone intramuscularly or intravenously on day 3 postpartum to 20 women, peak milk levels averaged about 0.7 and 0.5 mg/L, respectively. Peaks occurred about 4 hours after the dose and fell very slowly over 24 hours with half-lives of 13 to 17 hours. The amounts in milk represent an infant dosage of about 0.5% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother who was exclusively nursing her 52-day-old infant developed a soft-tissue infection. She was treated with intravenous teicoplanin 400 mg every 12 hours for 3 doses, then 400 mg daily for 5 days total, intravenous ceftriaxone 1 gram daily, topical mupirocin cream twice daily. A careful follow-up indicated that her infant had no adverse effects.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kafetzis DA, Brater DC, Fanourgakis JE, et al. Ceftriaxone distribution between maternal blood and fetal blood and tissues at parturition and between blood and milk postpartum. Antimicrob Agents Chemother 1983;23:870-3.6311089
2 Kaplan YC, Keskin-Arslan E, Acar S, et al. Teicoplanin use during breastfeeding. Breastfeed Med 2017;12:124.28051878

## Substance Identification

### Substance Name

Ceftriaxone

### CAS Registry Number

73384-59-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins